# Temsirolimus

CASRN: 162635-04-3

## Drug Levels and Effects

### Summary of Use during Lactation

Temsirolimus is a prodrug of sirolimus. Because no information is available on the use of temsirolimus or sirolimus during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant. The manufacturer recommends that breastfeeding be discontinued during temsirolimus therapy and for 3 weeks following the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Azathioprine, Cyclosporine, Tacrolimus

## Substance Identification

### Substance Name

Temsirolimus

### CAS Registry Number

162635-04-3

### Drug Class

Breast Feeding

Lactation

Immunosuppressive Agents